# Setmelanotide

CASRN: 920014-72-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of setmelanotide during breastfeeding. Because setmelanotide is a peptide molecule with a molecular weight of 1117 daltons that is 79% bound to plasma proteins, the amount in milk is likely to be very low and absorption is unlikely because it is probably destroyed in the infant’s gastrointestinal tract. However, until more data become available, an alternate drug is preferred, especially while nursing a newborn or preterm infant. The manufacturer recommends that breastfeeding be discontinued during therapy.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Maslin K, Shawe J, Blowers S, . Incretin-based medications in women and reproduction: A systematic scoping review and consensus guidelines for clinical practice. Obes Rev 2026:e70203.

### Alternate Drugs to Consider

Semaglutide, Tirzepatide

## Substance Identification

### Substance Name

Setmelanotide

### CAS Registry Number

920014-72-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypoglycemic Agents

Incretins

Glucagon-Like Peptide-1 Agonists

GLP-1 Agonists